# Carmustine

CASRN: 154-93-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of carmustine during breastfeeding. Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, especially alkylating agents such as carmustine.[1] The manufacturer recommends that breastfeeding be discontinued during carmustine therapy and for 1 month after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Some evidence indicates that carmustine can increase serum prolactin.[2] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.
2 Constine LS, Rubin P, Woolf PD, et al. (1987). Hyperprolactinemia and hypothyroidism following cytotoxic therapy for central nervous system malignancies. J Clin Oncol.

## Substance Identification

### Substance Name

Carmustine

### CAS Registry Number

154-93-8

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents, Alkylating

Nitrosourea Compounds